# Etesevimab and Bamlanivimab

CASRN: 2423948-94-9; 2423943-37-5

## Drug Levels and Effects

### Summary of Use during Lactation

The distribution of etesevimab and bamlanivimab was stopped in June of 2021 because of a lack of efficacy against COVID-19 variants. Etesevimab and bamlanivimab are monoclonal antibodies directed against the SARS-CoV-2 virus that causes COVID-19. No information is available on their clinical use during breastfeeding. Because etesevimab and bamlanivimab are large protein molecules with molecular weights of 146,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nirmatrelvir, Remdesevir

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Etesevimab

### CAS Registry Number

2423948-94-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antibodies, Viral

Antiviral Agents